# Clotiazepam

CASRN: 33671-46-4

## Drug Levels and Effects

### Summary of Use during Lactation

Clotiazepam is not approved for marketing in the United States by the U.S. Food and Drug Administration. Very little information is available on the passage of clotiazepam into milk. One review recommends avoiding clotiazepam during breastfeeding.[1] An alternate drug is preferred, especially while nursing a newborn or preterm infant. If clotiazepam is used, monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. A woman who was taking oral clotiazepam 5 mg daily donated a milk sample between 3 and 6 days postpartum at 1 hour after a dose at the estimated peak serum concentration. She had a 1-hour milk level of 16.3 mcg/L.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Lorazepam, Oxazepam, Temazepam

### References

1 Bascoul C, Franchitto L, Parant O, et al. [Psychotropic drugs during pregnancy and lactation: Development practice]. Presse Med 2015;44:271–83.25595818
2 Nishimura A, Furugen A, Umazume T, et al. Benzodiazepine concentrations in the breast milk and plasma of nursing mothers: Estimation of relative infant dose. Breastfeed Med 2021;16:424-31.33449825

## Substance Identification

### Substance Name

Clotiazepam

### CAS Registry Number

33671-46-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Anti-Anxiety Agents

Benzodiazepines